# Barley

## Drug Levels and Effects

### Summary of Use during Lactation

Barley (Hordeum vulgare) contains starch, dietary fiber such as beta-glucan, and the enzyme diastase. Barley is a purported galactogogue and is used by mothers in many cultures to increase their milk supply.[1-6] Some animal evidence indicates that a polysaccharide in barley can increase serum prolactin,[5,7,8] and some evidence of galactogogue activity of barley malt and lemon balm in mothers of preterm infants.[9,10] Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[11,12] No data exist on the excretion of any components of barley into breastmilk, or on the efficacy of barley as a galactogogue. Barley is safe to be consumed during breastfeeding, except by persons with celiac disease. Allergy to barley occurs rarely.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Studies in animals indicate that a polysaccharide found in barley is apparently responsible for an increase in prolactin after beer ingestion.[5,7,8] Refer to the LactMed record on Alcohol for details.

A double-blind study compared a commercial galactogogue product (Femaltiker, Nutropharma Llc., Poland) containing barley malt, 70% barley glucan and powdered lemon balm (Melissa officinalis) leaves to an identical placebo in the mothers of preterm infants. Mothers took one packet twice a day for 2 weeks, starting within 3 days of delivery. Milk volume was measured by mothers after extraction using an electric breast pump. Forty mothers in each group completed the study. On day 14 of the study the mothers in the barley group produced more milk than the mothers taking placebo (average 95 mL vs 62.5 mL). The total milk volume over the 2-week period was also greater in the active group compared to the placebo group (average 6036 mL vs 4209 mL).[9] The study had a rather high dropout rate and the results were not subjected to intention-to-treat analysis.

A meta-analysis of randomized, controlled studies in the mothers of preterm neonates examined the efficacy of various herbal galactogogues in increasing milk supply. The authors concluded that a commercial product of barley malt with lemon balm (Femaltiker®) provided a significant increase in milk volume on day 4 postpartum, but low certainty evidence that it increases milk volume at day 7 and very low certainty evidence that the product increases milk volume throughout the 14-day intervention period.[10]

### References

1 Chaudhuri RN, Ghosh BN, Chatterjee BN. Diet intake patterns of non-Bengali Muslim mothers during pregnancy and lactation. Indian J Public Health 1989;33:82–3.2641755
2 Yarnell E. Botanical medicine in pregnancy and lactation. Altern Complement Ther 1997;3 (April):93–100. doi:10.1089/act.1997.3.93
3 Scott CR, Jacobson H. A selection of international nutritional and herbal remedies for breastfeeding concerns. Midwifery Today Int Midwife 2005;75:38–9.16320878
4 Winterfeld U, Meyer Y, Panchaud A, et al. Management of deficient lactation in Switzerland and Canada: A survey of midwives' current practices. Breastfeed Med 2012;7:317–8.22224508
5 Sawadogo L, Thibault JF, Rouau X, et al. The lactogenic action of plant extracts. In: Martinet J, Houdebine L, Herbert H, eds. Biology of lactation. Paris: Institut National de la Research Agrono; 1999:553–64.
6 Erarslan ZB, Kültür S. Medicinal plants traditionally used to increase breast milk in Turkey: An ethnobotanical review. J Herbal Med 2024;44:100849. doi:10.1016/j.hermed.2024.100849
7 Sawagado L, Houdebine LM. Identification of the lactogenic compound present in beer. Ann Biol Clin (Paris) 1988;46:129–34.3382062
8 Koletzko B, Lehner F. Beer and breastfeeding. Adv Exp Med Biol 2000;478:23–8.11065057
9 Wesolowska A, Pietrzak B, Kociszewska-Najman B, et al. Barley malt-based composition as a galactagogue - a randomized, controlled trial in preterm mothers. Ginekol Pol 2021;92:118–25.33751522
10 Cragg A, Levene I, Darabi S, et al. Herbal galactagogues to improve breastmilk production and lactation in mothers of preterm babies: A systematic review of clinical trials. Eur J Clin Nutr 2026;80:146–58.41350450
11 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
12 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531

## Substance Identification

### Substance Name

Barley

### Scientific Name

Hordeum vulgare; Hordeum distychum

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Galactogogues

Phytotherapy

Plants, Medicinal